# Trovafloxacin

CASRN: 147059-72-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of trovafloxacin during breastfeeding; however, amounts in breastmilk appear to be low. Fluoroquinolones have traditionally not been used in infants because of concern about adverse effects on the infants' developing joints. However, recent studies indicate little risk.[1,2] The calcium in milk might prevent absorption of the small amounts of fluoroquinolones in milk,[3] but insufficient data exist to prove or disprove this assertion. Use of trovafloxacin is acceptable in nursing mothers with monitoring of the infant for possible effects on the gastrointestinal flora, such as diarrhea or candidiasis (thrush, diaper rash). However, it is preferable to use an alternate drug for which safety information is available.

### Drug Levels

Maternal Levels. The manufacturer reports that trovafloxacin was found in the breast milk of three lactating subjects. The average measurable breastmilk concentration was 0.8 mcg/mL (range 0.3 to 2.1 mcg/mL) after a single intravenous alatrofloxacin dose equivalent to 300 mg of trovafloxacin. Further details on the study are not available.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ciprofloxacin, Levofloxacin

### References

1 Gürpinar AN, Balkan E, Kiliç N, et al. The effects of a fluoroquinolone on the growth and development of infants. J Int Med Res 1997;25:302-6.9364293
2 van den Oever HL, Versteegh FG, Thewessen EA, et al. Ciprofloxacin in preterm neonates: Case report and review of the literature. Eur J Pediatr 1998;157:843-5.9809826
3 Fleiss PM. The effect of maternal medications on breast-feeding infants. J Hum Lact 1992;8:7.1558663

## Substance Identification

### Substance Name

Trovafloxacin

### CAS Registry Number

147059-72-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Quinolones

Fluoroquinolones